# Eptifibatide

CASRN: 188627-80-7

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No published information is available on the use of eptifibatide during breastfeeding. Because eptifibatide is a peptide, absorption by the infant is unlikely because it is probably destroyed in the infant's gastrointestinal tract. Until more data become available, eptifibatide should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. If it is used by a nursing mother, monitor the infant for bruising and bleeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aspirin

## Substance Identification

### Substance Name

Eptifibatide

### CAS Registry Number

188627-80-7

### Drug Class

- Breastfeeding
- Lactation
- Platelet Aggregation Inhibitors